# Isavuconazole

CASRN: 241479-67-4

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of isavuconazole during breastfeeding. Because isavuconazole is more than 99% bound to plasma proteins, the amount in milk is likely to be low. However, there is no published experience with isavuconazole during breastfeeding, so an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Fluconazole, Miconazole

## Substance Identification

### Substance Name

Isavuconazole

### CAS Registry Number

241479-67-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antifungal Agents